# Hydroflumethiazide

CASRN: 135-09-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the amount of hydroflumethiazide in breastmilk. Intense diuresis with large doses may decrease breastmilk production. Other diuretics in low doses are preferred over hydroflumethiazide.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information on hydroflumethiazide was not found as of the revision date. Intense diuresis with thiazides and thiazide-like diuretics, fluid restriction and breast binding have been used to suppress postpartum lactation.[1-3] The added contribution of the diuretic to these measures, which are effective in suppressing lactation, has not been studied. There are no data on the effects of diuretics on established, ongoing lactation.

### Alternate Drugs to Consider

Chlorothiazide, Hydrochlorothiazide

### References

1 Stout G. Suppression of lactation. Br Med J 1962;1:1150.18117911
2 Healy M. Suppressing lactation with oral diuretics. Lancet 1961;277(7190):1353-4. doi: 10.1016/S0140-6736(61)90289-6
3 Reiher KH. Suppression of lactation by stimulation of diuresis. Zentralbl Gynakol 1963;85:188-90.13973786

## Substance Identification

### Substance Name

Hydroflumethiazide

### CAS Registry Number

135-09-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Thiazide Diuretics